# Yttrium 90 Ibritumomab Tiuxetan

CASRN: 1460293-15-5

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of yttrium 90 ibritumomab tiuxetan as a therapeutic agent. No information is available on the use of yttrium 90 ibritumomab tiuxetan during breastfeeding. Because of the long half-life of yttrium 90, the manufacturer and expert opinion recommend not administering the drug in women who wish to continue breastfeeding.[1] If the drug is administered to a nursing mother, breastfeeding should be discontinued. No restrictions on holding the infant after administration of the drug are necessary.[2]

### Drug Levels

Yttrium-90 decays by emission of beta particles, with a physical half-life of 64.1 hours and a decay energy of 2.28 MeV.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Goldsmith SJ. Radioimmunotherapy of lymphoma: Bexxar and Zevalin. Semin Nucl Med 2010;40:122-35.20113680
2 Gulec SA, Siegel JA. Posttherapy radiation safety considerations in radiomicrosphere treatment with 90Y-microspheres. J Nucl Med 2007;48:2080-6.18006608

## Substance Identification

### Substance Name

Yttrium 90 Ibritumomab Tiuxetan

### CAS Registry Number

1460293-15-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Yttrium Radioisotopes